# LactRx App

LactRx was developed and is maintained by the Organization of Teratogen Information Specialists/MotherToBaby. LactRx content is identical to LactMed and is updated monthly. LactRx is free and can be downloaded from the Apple or Android stores.

## LactRx App for iPhone/iPod Touch

• Free App at the Apple App Store (https://apps.apple.com/us/app/lactrx/id6443953070)

• System requirements: iPhone OS 11.0 or later.

## LactRx App for Android Devices

• Free App at the Android Market (https://play.google.com/store/apps/details?id=org.mothertobaby.lactrx)

• System requirements: Android 5.0 or higher